# Geranium

## Drug Levels and Effects

### Summary of Use during Lactation

Geranium (Pelargonium species) leaves contain small amounts of dimethylamylamine which is a sympathomimetic stimulant. Rose geranium (Pelargonium graveolens) oil contains citronellol, citronellyl acetate, citronellyl formate, and geraniol. Applied topically, the essential oil may have antibacterial and antifungal activity and has been used for neuropathic pain. Topical application of fresh, whole geranium leaves, furry side against the skin has been used for cracked, painful nipples during breastfeeding.[1-3] Alternatively, geranium essential oil mixed into calendula cream has been advocated for the same purpose.[3] None of these claims have been scientifically validated.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Matthews AJ. (1995). Geranium leaves for cracked nipples. Aust J Hosp Pharm.
2 Petrie KA, Peck MR. (2000). Alternative medicine in maternity care. Prim Care.
3 Stapleton H. (1995). The use of herbal medicine in pregnancy and labour. Part II: Events after birth, including those affecting the health of babies. Complement Ther Nurs Midwifery.

## Substance Identification

### Substance Name

Geranium

### Scientific Name

Pelargonium sp.

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal